# Ertapenem

CASRN: 153832-46-3

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that ertapenem produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush has been reported with beta-lactams, but these effects have not been adequately evaluated. Ertapenem is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Five women who were 5 to 14 days postpartum received ertapenem 1 gram daily for 3 to 10 days for acute pelvic infections. Breastmilk samples were obtained before the first dose and twice during the 24 hours after the last dose as well as daily in the morning for 2 to 5 days after the last dose. Milk concentrations during the first 24 hours of the last dose ranged from <0.125 mg/L to 0.38 mg/L. Milk concentration was <0.125 mg/L by day 3 in 4 of the women and after 5 days in the 5th.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Research FDA Center for Drug Evaluation and. NDA 21-337. Clinical pharmacology and biopharmaceutics reviews. [Accessed 02/06/2025]. 2008:37-40. https://www.accessdata.fda.gov/drugsatfda_docs/nda/2001/21337_Invanz_biopharmr.pdf

## Substance Identification

### Substance Name

Ertapenem

### CAS Registry Number

153832-46-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Carbapenems